# Pomalidomide

CASRN: 19171-19-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pomalidomide during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during pomalidomide therapy.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Pomalidomide

### CAS Registry Number

19171-19-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents

Angiogenesis Inhibitors